# Desvenlafaxine

CASRN: 93413-62-8

## Drug Levels and Effects

### Summary of Use during Lactation

Modest doses of desvenlafaxine are excreted into breastmilk, but serum drug levels of breastfed infants are less than 10% of simultaneous maternal levels. Total drug exposure of breastfed infants is about half of that experienced by breastfed infants whose mothers are taking venlafaxine.[1].

With the related drug venlafaxine, newborn infants of mothers who took the drug during pregnancy may experience poor neonatal adaptation syndrome as seen with other antidepressants such as SSRIs or SNRIs. Breastfed infants exposed to venlafaxine during the third trimester of pregnancy are at risk for neonatal withdrawal syndrome consisting of hypoglycemia, tremors, tachycardia, or hypotonia, and might be at a greater risk of readmission due to jaundice.[2,3]

### Drug Levels

Desvenlafaxine (O-desmethylvenlafaxine) is an active metabolite of venlafaxine with similar antidepressant activity.[4]

Maternal Levels. Ten lactating women with postpartum depression who were an average of 4.3 (range 0.9 to 12.7) months postpartum were taking extended-release desvenlafaxine (Pristiq) from 4 to 35 days in doses of 50 to 150 mg daily or an average of 1.2 mg/kg daily (95% CI: 0.93 to 1.5 mg/kg daily). Each woman provided up to 8 milk samples over a 24-hour period. Peak milk concentrations occurred at an average of 3.3 hours after the dose. An exclusively breastfed infant in this study would have received an estimated 85 mcg/kg daily or 6.8% (95% CI: 5.5 to 8.1%) of the maternal weight-adjusted dosage.[1]

A nursing mother was taking oral desvenlafaxine 250 mg and amisulpride 100 mg twice daily. Eight breastmilk samples were obtained over a 24-hour period with a breast pump. The average breastmilk concentration was 1.9 mg/L which equated to an infant dose of 0.29 mg/kg daily or 7.8% of the maternal weight-adjusted dosage.[5]

Infant Levels. Ten infants with an average age of 4.3 (range 0.9 to 12.7) months were breastfed (8 exclusively) during maternal use of desvenlafaxine in doses of 50 to 150 mg daily or an average of 1.2 mg/kg daily. The infants had an average serum desvenlafaxine level of 16 mcg/L, which averaged 4.8% of the simultaneous maternal serum concentration taken at about 6.5 hours after the maternal dose. Considering only the exclusively breastfed infants, infant exposure would have averaged 5.8% of the maternal serum concentration.[1]

A nursing mother was taking oral desvenlafaxine 250 mg and amisulpride 100 mg twice daily for 12.6 weeks. Her partially breastfed infant was 5 months old. The infant’s serum desvenlafaxine concentration 3.1 hours after the mother’s daily dose was 13 mcg/L or 1.7% of the maternal serum concentration.[5]

### Effects in Breastfed Infants

Ten infants ranging in age from 0.9 to 12.7 months were breastfed (8 exclusively) during maternal use of desvenlafaxine in doses of 50 to 150 mg daily or an average of 1.2 mg/kg daily. Mothers were also taking lorazepam (n = 6), quetiapine (n = 5), lamotrigine (n = 2), levonorgestrel (n = 2), domperidone (n = 1), and temazepam (n = 1). Infants were studied after an average of 9 days of exposure (range 4 to 35 days) of desvenlafaxine exposure via breastmilk. At the time of the study, 7 of the 10 infants were at a lower growth percentile than at the time of birth. Examination by a pediatrician found that all infants were healthy and had Denver developmental scores that matched their age on the day of the study.[1]

A woman with depressive type schizoaffective disorder was taking lurasidone 40 mg at night and desvenlafaxine 50 mg daily after giving birth. She exclusively breastfed her infant. The infant’s growth and development was good during a follow-up period of 39 days.[6]

### Effects on Lactation and Breastmilk

In an outpatient study that followed 1395 patients who received long-term desvenlafaxine therapy, 2 patients developed elevated serum prolactin levels and one developed galactorrhea.[7] The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[8] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[9] None of the mothers were taking desvenlafaxine.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[10]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Rampono J, Teoh S, Hackett LP, . Estimation of desvenlafaxine transfer into milk and infant exposure during its use in lactating women with postnatal depression. Arch Womens Ment Health 2011;14:49-53.20960017
2 Wang J, Cosci F. Neonatal withdrawal syndrome following late in utero exposure to selective serotonin reuptake inhibitors: A systematic review and meta-analysis of observational studies. Psychother Psychosom 2021;90:299-307.33971648
3 Cantin C, Li W, Snelgrove-Clarke E, . Examining the effect of newborn feeding method on postnatal length of stay and healthcare utilisation among Neonates With In-utero SSRI Exposure (NeoWISE): a retrospective cohort study. BMJ Paediatr Open 2026;10
4 Weissman AM, Levy BT, Hartz AJ, . Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
5 Ilett KF, Watt F, Hackett LP, . Assessment of infant dose through milk in a lactating woman taking amisulpride and desvenlafaxine for treatment-resistant depression. Ther Drug Monit 2010;32:704-7.20926994
6 Keightley P, Schmidt Sotomayor N, O’Hara K, . Lurasidone in lactation: A case study with laboratory and clinical outcomes. Aust N Z J Psychiatry 2020;54:1035-6.32611245
7 Tourian KA, Pitrosky B, Padmanabhan SK, . A 10-month, open-label evaluation of desvenlafaxine in outpatients with major depressive disorder. Prim Care Companion CNS Disord 2011;13:PCC.10m00977.21977353
8 Venkatesh KK, Castro VM, Perlis RH, . Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
9 Leggett C, Costi L, Morrison JL, . Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
10 Grzeskowiak LE, Saha MR, Nordeng H, . Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Desvenlafaxine

### CAS Registry Number

93413-62-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin-Norepinephrine Reuptake Inhibitors